# Nedocromil

CASRN: 69049-73-6

## Drug Levels and Effects

### Summary of Use during Lactation

Nedocromil is no longer marketed in the United States. No published experience exists with nedocromil during breastfeeding, but the amounts absorbed from ophthalmic drops are unlikely to affect the breastfed infant. Other agents may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cromolyn, Ketotifen

## Substance Identification

### Substance Name

Nedocromil

### CAS Registry Number

69049-73-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Allergic Agents

Anti-Asthmatic Agents